# Enlicitide

CASRN: 2407527-14-2

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of enlicitide during breastfeeding. If a mother requires enlicitide, it is not a reason to discontinue breastfeeding. Because enlicitide is a large molecule with a molecular weight of 1722 Da, the amount in milk is likely to be very low.[1] Until more data become available, enlicitide should be used with caution during breastfeeding, especially while nursing a newborn or preterm infant. Waiting for at least 2 weeks postpartum to resume therapy may minimize transfer to the infant.[3]

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Enlicitide

### CAS Registry Number

2407527-14-2

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anticholesteremic Agents

Hypolipidemic Agents